# Tioconazole

CASRN: 65899-73-2

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Vaginal tioconazole has not been studied during breastfeeding. Other antifungal agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Miconazole

## Substance Identification

### Substance Name

Tioconazole

### CAS Registry Number

65899-73-2

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antifungal Agents
- Dermatologic Agents